# Gadobenate

CASRN: 113662-23-0

## Drug Levels and Effects

### Summary of Use during Lactation

Gadobenate has been safely used in infants, so maternal use does not appear to pose a substantial risk to a breastfed infant.[1] Guidelines developed by North American professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[2-4]

### Drug Levels

Maternal Levels. The manufacturer reports that limited literature indicates that breastfeeding after gadobenate dimeglumine administration to the mother would result in the infant receiving an oral dose of 0.001%-0.04% of the maternal dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Fraum TJ, Ludwig DR, Bashir MR, et al. Gadolinium-based contrast agents: A comprehensive risk assessment. J Magn Reson Imaging 2017;46:338-53 28083913
2 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
3 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
4 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Gadobenate

### CAS Registry Number

113662-23-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents